# Nicardipine

CASRN: 55985-32-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of nicardipine in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

Maternal Levels. Ten women were treated with oral nicardipine 4 to 14 days postpartum. Four received an immediate-release product 40 to 80 mg daily, and 6 received a sustained-release product 100 to 150 mg daily. Another woman received intravenous nicardipine 120 mg daily. The authors calculated that the infants received an average of 0.073% of the maternal weight-adjusted dose with the oral dosage and 0.14% of the maternal weight-adjusted dose with the intravenous dosage. They estimated that the average dosage that an infant would receive is about 0.3% of the projected infant dosage.[1]

Seven women received intravenous infusions of nicardipine for an average of 1.9 days in the immediate postpartum period as therapy for pre-eclampsia. Thirty-four milk samples were obtained at unspecified times; nicardipine was undetectable (<5 mcg/L) in 82% of samples. Four women receiving 1 to 6.5 mg/hour of nicardipine had 6 milk samples with detectable nicardipine ranging from 5.1 to 18.5 mcg/L. The highest concentration of 18.5 mcg/L was found in a woman receiving 5.5 mg/hour of nicardipine. The authors estimated that the maximum dose that could be received by a breastfed infant was less than 0.3 mcg daily or between 0.015 to 0.004% of a therapeutic dose in a 1 kg infant.[2]

Eighteen women with severe preeclampsia were given continuous infusion of nicardipine to control their blood pressure during pregnancy and postpartum. Blood and breastmilk samples were taken between 2 and 7 days postpartum from 17 of the women. The median postpartum nicardipine dosage was 0.54 mg/kg daily (mean 0.26 0.54 mg/kg daily; range 0.43 to 1.63 mg/kg daily). The median breastmilk nicardipine concentration in milk was 4.7 mcg/L (mean 6.9 mcg/L; range 2.3 to 37.7 mcg/L). Milk nicardipine levels were proportional to maternal plasma levels. The median weight-adjusted percentage of the maternal dose was 0.045% (mean 0.08%; range 0.006 to 0.33%).[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nifedipine

### References

1 Jarreau PH, Le Beller C, Guillonneau M, et al. Excretion of nicardipine in human milk. Paediatr Perinat Drug Ther 2000;4:28-30.
2 Bartels PA, Mathot RAA, Steegers EAP, et al. Nicardipine in pre-eclamptic patients: Placental transfer and disposition in breast milk. BJOG 2007;114:230-3.17166219
3 Matsumura H, Takagi K, Seki H, et al. Placental transfer of intravenous nicardipine and disposition into breast milk during the control of hypertension in women with pre-eclampsia. Hypertens Pregnancy 2014;33:93-101.24131296

## Substance Identification

### Substance Name

Nicardipine

### CAS Registry Number

55985-32-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Calcium Channel Blockers

Vasodilator Agents